# Echinacea

CASRN: 84696-11-7; 90028-20-9; 97281-15-7

## Drug Levels and Effects

### Summary of Use during Lactation

Echinacea species (Echinacea angustifolia, Echinacea purpurea, Echinacea pallida) contain high molecular weight polysaccharides (e.g., heteroxylan, arabinogalactan) and lower molecular weight compounds (e.g., alkylamides, caffeoyl conjugates such as cichoric acid and echinacosides), but no single chemical is known to be responsible for Echinacea's biological activity. Some products have been standardized based on echinacoside, and others on cichoric acid. Echinacea has no specific uses during breastfeeding, but is commonly used orally to treat or prevent upper respiratory infections. Excretion of some of the purportedly active alkamides was found in breastmilk in one mother. No data exist on the safety and efficacy of Echinacea in nursing mothers or infants. In general, Echinacea is well tolerated with gastrointestinal upset, diarrhea and constipation, skin rash and rarely allergic reactions reported. It may also alter the metabolism of some dugs metabolized by the P450 enzyme system. Some sources indicate that Echinacea is safe in recommended doses,[1] while others recommend avoiding it during breastfeeding because of the lack of published safety data. Echinacea has also been used topically to treat skin infections. A topical combination with Calendula (Calendit-E) was more effective than breastmilk in treating sore and cracked nipples in one study.[2-4]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. One woman was given 4 Echinacea Premium tablets (each containing the equivalent of 675 mg of Echinacea purpurea root and 600 mg of Echinacea angustifolia root made from the dried ethanolic extracts). The total dose of N-isobutyldodeca-2E,4E,8Z,10E/Z-tetraenamide alkamides was 13.1 mg. The alkamides were present in breastmilk between 1 and 4 hours after ingestion in concentrations similar to those reported in the blood with the same dose of the product.[5] Further details were not present in the abstract.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Perri D, Dugoua JJ, Mills E, et al. Safety and efficacy of echinacea (Echinacea augustafolia, E. purpurea and E. pallida) during pregnancy and lactation. Can J Clin Pharmacol 2006;13:e262-7.17085774
2 Niazi A, Rahimi VB, Soheili-Far S, et al. A systematic review on prevention and treatment of nipple pain and fissure: Are they curable? J Pharmacopuncture 2018;21:139-50.30283701
3 As'adi N, Kariman N. Herbal prevention and treatment of nipple trauma and/or pain in Iranian studies: A systematic review. J Herbmed Pharmacol 2018;7:168-75. doi:10.15171/jhp.2018.28
4 Pezeshki B, Pouredalati M, Zolala S, et al. Comparison of the effect of aloe vera extract, breast milk, calendit-E, curcumin, lanolin, olive oil, and purslane on healing of breast fissure in lactating mothers: A systematic review. International Journal of Pediatrics (Mashhad) 2020;8:10853-63. doi:10.22038/ijp.2020.46125.3760
5 Matthias A, Merika H, Addison RS, et al. Bioavailability of Echinacea alkamides in human breast milk. Planta Med 2008;74:921. doi:10.1055/s-002-12952

## Substance Identification

### Substance Name

Echinacea

### Scientific Name

Echinacea angustifolia; Echinacea purpurea; Echinacea pallida

### CAS Registry Number

84696-11-7; 90028-20-9; 97281-15-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal